# Rolapitant

CASRN: 552292-08-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of rolapitant during breastfeeding. Because rolapitant and its metabolites are more than 99% bound to plasma proteins, the amount in milk is likely to be low; however, the binding of its major active metabolite is not known. If the mother requires rolapitant, it is not a reason to discontinue breastfeeding. However, consideration should be given to any chemotherapy the mother is receiving.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Rolapitant

### CAS Registry Number

552292-08-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Neurokinin-1 Receptor Antagonists